# Felodipine

CASRN: 72509-76-3

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of felodipine during breastfeeding, an alternate drug may be preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Amlodipine, Nifedipine, Nitrendipine

## Substance Identification

### Substance Name

Felodipine

### CAS Registry Number

72509-76-3

### Drug Class

Breast Feeding

Lactation

Antihypertensive Agents

Calcium Channel Blockers

Vasodilator Agents